# Suvorexant

CASRN: 1030377-33-3

## Drug Levels and Effects

### Summary of Use during Lactation

The amounts of suvorexant in milk are very low. If suvorexant is required by the mother, it is not a reason to discontinue breastfeeding. If suvorexant is used, monitor the infant for sedation, especially in a newborn or preterm infant.

### Drug Levels

Maternal Levels. Two women were taking suvorexant 20 mg at night. They provided milk samples “a few days” after delivery. One woman provided a sample before a dose and 70 minutes after a dose. The concentrations in those samples were 1.36 and 2.85 mcg/L. The second woman provided samples a few days and one month after delivery taken at unknown times the day after taking the drug. The milk concentrations were 3.47 and 4.09 mcg/L, respectively. The authors estimated the relative infant dosages to be 0.17 and 0.2% in the two women, respectively.[1,2]

The manufacturer reports a study in which a single 20 mg dose of suvorexant was given to 12 healthy lactating women. The peak milk levels of 27.19 mcg/L at 2 hours after the dose. The mean amount of suvorexant recovered in breastmilk was 0.011 mg following a 20 mg maternal dose. The calculated mean daily infant dose was 0.00155 mg/kg based on the actual infant body weight. The relative infant dose of suvorexant was 0.691%. The relative infant dose of the drug plus its metabolite hydroxysuvorexant was less than 1% of the maternal dose.[3]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Zaleplon, Zolpidem

### References

1 Ishikawa H, Furugen A, Nishimura A, . Validated UPLC-MS/MS method for quantification of melatonin receptor agonists and dual orexin receptor antagonists in human plasma and breast milk: Application to quantify suvorexant and lemborexant in clinical samples. J Pharm Biomed Anal 2024;251:116432.39180895
2 Furugen A. Safety assessment of medications during pregnancy and breastfeeding based on quantitative and toxicological analyses. Biol Pharm Bull 2025;48:337-43.40175155
3 McCrea J, Litovsky A, Wickremasingha P, . Plasma and breast milk pharmacokinetics of suvorexant in healthy lactating women. Br J Clin Pharmacol 2026

## Substance Identification

### Substance Name

Suvorexant

### CAS Registry Number

1030377-33-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Hypnotics and Sedatives

Orexin Receptor Antagonists

Sleep Aids, Pharmaceutical